# Thiethylperazine

CASRN: 1420-55-9

## Drug Levels and Effects

### Summary of Use during Lactation

Based on minimal excretion of other phenothiazine derivatives, it appears that occasional short-term use of thiethylperazine for the treatment of nausea and vomiting poses little risk to the breastfed infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Phenothiazines cause galactorrhea in 26 to 40% of female patients.[1,2] Hyperprolactinemia appears to be the cause of the galactorrhea.[3-5] The hyperprolactinemia is caused by the drug's dopamine-blocking action in the tuberoinfundibular pathway.[6]

### References

1 Polishuk WZ, Kulcsar S. (1956). Effects of chlorpromazine on pituitary function. J Clin Endocrinol Metab.
2 Hooper JH, Welch VC, Shackelford RT. (1961). Abnormal lactation associated with tranquilizing drug therapy. JAMA.
3 Turkington RW. (1972). Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med.
4 Turkington RW. (1972). Serum prolactin levels in patients with gynecomastia. J Clin Endocrinol Metab.
5 Meltzer HY, Fang VS. (1976). The effect of neuroleptics on serum prolactin in schizophrenic patients. Arch Gen Psychiatry.
6 Maguire GA. (2002). Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry.

## Substance Identification

### Substance Name

Thiethylperazine

### CAS Registry Number

1420-55-9

### Drug Class

Breast Feeding

Lactation

Antiemetics

Phenothiazines

Gastrointestinal Agents